# Bosentan

CASRN: 147536-97-8

## Drug Levels and Effects

### Summary of Use during Lactation

A study in one patient taking bosentan during breastfeeding found very low levels in milk. Another woman breastfed her preterm newborn while taking bosentan and sildenafil with no adverse effects reported. Amounts ingested by the infant are far below doses given to treat infants and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A woman breastfeeding her 21-month-old infant was taking 125 mg bosentan twice daily and 20 mg sildenafil 3 times daily to treat pulmonary arterial hypertension. She pumped three milk samples collected at home over 24 hours on days 637 and 651 postpartum. Bosentan milk concentrations ranged from 23.2 mcg/L at 10 hours after the morning dose to 86.1 mcg/L at 6 hours after the morning dose. The average steady-state milk concentration of bosentan was 49 mcg/L. The patient’s infant was breastfed 3 times daily. The estimated infant doses via milk on the two days were 0.29 and 0.60 mcg/kg in this partially breastfed infant. A fully breastfed infant might receive a dosage as high as 7.43 mcg/kg daily, which translate into a relative infant dose of 0.24%. This dosage would also be far below the infant therapeutic dosage of 4 mg/kg.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 23-year-old woman with congenital heart disease and pulmonary hypertension was treated during pregnancy with bosentan and sildenafil in unspecified dosages. These drugs and warfarin were continued postpartum. Her infant was delivered at 30 weeks by cesarean section and weighed 1.41 kg at birth. She nursed the infant in the neonatal intensive care unit for 11 weeks “with good outcome” according to the authors, but the infant died at 26 weeks from a respiratory syncytial virus infection.[2]

A woman breastfeeding her 21-month-old infant was taking 20 mg of sildenafil 3 times daily and 125 mg of bosentan twice daily to treat pulmonary arterial hypertension. The drugs were begun more than 6 months postpartum. The mother did not report any possible adverse effects, serious health problem or hospitalization of the infant in the period from birth until day 651 postpartum when the infant continued to be partially breastfed.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

### References

1 Nauwelaerts N, Ceulemans M, Deferm N, . Case report: Bosentan and sildenafil exposure in human milk - a contribution from the ConcePTION Project. Front Pharmacol 2022;13:881084.35784689
2 Molelekwa V, Akhter P, McKenna P, . Eisenmenger’s syndrome in a 27 week pregnancy--management with bosentan and sildenafil. Ir Med J 2005;98:87–8.15869069

## Substance Identification

### Substance Name

Bosentan

### CAS Registry Number

147536-97-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Endothelin Receptor Antagonists

Vasodilator Agents